# Cefiderocol

CASRN: 1225208-94-5

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of cefiderocol during breastfeeding, cephalosporins are generally not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefiderocol is acceptable to use in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Cefiderocol

### CAS Registry Number

1225208-94-5

### Drug Class

Breast Feeding

Lactation

Anti-Bacterial Agents

Anti-Infective Agents

Cephalosporins